# Pentoxifylline

CASRN: 6493-05-6

## Drug Levels and Effects

### Summary of Use during Lactation

Limited data indicate that pentoxifylline is poorly excreted into breastmilk. It would not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months.

### Drug Levels

Maternal Levels. Five women who had been breastfeeding for at least 6 weeks received a single 400 mg oral dose of a sustained-release form of pentoxifylline. The average total milk concentration of pentoxifylline plus its 3 active metabolites was 419 mcg/L at 2 hours after the dose and 982 mcg/L at 4 hours.[1] Using the peak milk level data from this study, an exclusively breastfed infant would receive an estimated maximum of 147 mcg/kg daily with this maternal dosage regimen or about 2% of the maternal weight-adjusted dosage.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Witter FR, Smith RV. (1985). The excretion of pentoxifylline and its metabolites into human breast milk. Am J Obstet Gynecol.

## Substance Identification

### Substance Name

Pentoxifylline

### CAS Registry Number

6493-05-6

### Drug Class

Breast Feeding

Lactation

Hematologic Agents

Phosphodiesterase Inhibitors

Platelet Aggregation Inhibitors

Xanthines